# Pegloticase

CASRN: 885051-90-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pegloticase during breastfeeding. Because pegloticase is a very large molecule with molecular weight of 540,000 Da, and composed of smaller subunits with molecular weights of 34,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Polyethylene glycol is not excreted into breastmilk.[3] Until more safety data become available, an alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Allopurinol, Probenecid

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432

## Substance Identification

### Substance Name

Pegloticase

### CAS Registry Number

885051-90-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antigout Agents

Gout Suppressants